# Misoprostol

CASRN: 59122-46-2

## Drug Levels and Effects

### Summary of Use during Lactation

Misoprostol is a prostaglandin E1 analogue. Prostaglandin E1 and other prostaglandins appear normally in colostrum and milk.[1] Because of the extremely low levels of misoprostol in breastmilk, amounts ingested by the infant are trivial and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

After absorption, misoprostol is rapidly converted into misoprostol acid in the liver. Studies of misoprostol measure misoprostol acid in the colostrum or milk.

Maternal Levels. Twenty women received misoprostol 600 mcg orally during the first 4 days postpartum. Twelve of them collected a total of 24 colostrum samples at various times during the first 5 hours after the dose. The average misoprostol concentration was highest in colostrum 1 hour after the dose at 20.9 ng/L. Average concentrations fell to 17.8 ng/L at 2 hours after the dose, 9.4 ng/L at 3 hours, 2.8 ng/L at 4 hours and <1 ng/L at 5 hours after the dose.[2]

Ten women who averaged 3.9 days postpartum received a single oral dose of misoprostol 200 mcg. Milk samples were obtained from one breast from 0.5 to 5 hours after the dose. The mean and median peak milk levels were 7.6 and 3.6 ng/L, respectively, at 1.1 hours after the dose. In 2 women, the peak milk level occurred 2 hours after the dose. By 5 hours, the median milk level was 0.2 ng/L. The half-life in milk averaged 1.1 hours.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Oxytocic) Ergonovine, Methylergonovine; (Ulcers) Famotidine, Nizatidine, Omeprazole, Pantoprazole

### References

1 Shimizu T, Yamashiro Y, Yabuta K. (1992). Prostaglandin E1, E2, and F2 alpha in human milk and plasma. Biol Neonate.
2 Abdel-Aleem H, Villar J, Gulmezoglu AM, et al. (2003). The pharmacokinetics of the prostaglandin E1 analogue misoprostol in plasma and colostrum after postpartum oral administration. Eur J Obstet Gynecol Reprod Biol.
3 Vogel D, Burkhardt T, Rentsch K, et al. (2004). Misoprostol versus methylergometrine: Pharmacokinetics in human milk. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Misoprostol

### CAS Registry Number

59122-46-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Abortifacient Agents, Nonsteroidal

Anti-Ulcer Agents

Prostaglandins

Oxytocics

Gastrointestinal Agents